# Loxapine

CASRN: 1977-10-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of loxapine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Loxapine can elevate serum prolactin.[1] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[2]

The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Meltzer HY, Fang VS, Goode DJ. (1978). Prolactin and neuroleptics: Clinical implications for efficacy and toxicity. The effect of neuroleptics and alpha-methyl-para-tyrosine on serum prolactin levels in laboratory animals and man. Psychopharmacol Bull.
2 Maguire GA. (2002). Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry.

## Substance Identification

### Substance Name

Loxapine

### CAS Registry Number

1977-10-2

### Drug Class

Breast Feeding

Lactation

Antipsychotic Agents